# Lodoxamide

CASRN: 53882-12-5

## Drug Levels and Effects

### Summary of Use during Lactation

Lodoxamide is no longer marketed in the United States. Although no published data exist on the use of lodoxamide during lactation, maternal milk levels are likely to be very low after the use eye drops. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Lodoxamide

### CAS Registry Number

53882-12-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Allergic Agents

Histamine Antagonists